# Palbociclib

CASRN: 571190-30-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of palbociclib during breastfeeding. Because palbociclib is 85% bound to plasma proteins, the amount in milk is likely to be low. However, its half-life is about 29 hours and the manufacturer recommends that breastfeeding be discontinued during palbociclib therapy and for 3 weeks after the last dose. Palbociclib is also given in combination with letrozole or fulvestrant, which may increase the risk to the infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Palbociclib

### CAS Registry Number

571190-30-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors